# Idursulfase

CASRN: 50936-59-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of idursulfase during breastfeeding. Because it is a large protein molecule with a molecular weight of about 76,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. If idursulfase is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, idursulfase should be used with infant careful monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Idursulfase

### CAS Registry Number

50936-59-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy

Iduronate Sulfatase